# Avacopan

CASRN: 1346623-17-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of avacopan during breastfeeding. Because avacopan is over 99% bound to plasma proteins, the amount in milk is likely to be low. If the mother an older infant requires avacopan, it is not a reason to discontinue breastfeeding. but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910-26 40287311

## Substance Identification

### Substance Name

Avacopan

### CAS Registry Number

1346623-17-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents